# Selexipag

CASRN: 475086-01-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of selexipag during breastfeeding. Because selexipag is more than 99% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during selexipag therapy. Selexipag and its active metabolite should be completely eliminated from milk in 1 day.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Selexipag

### CAS Registry Number

475086-01-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Vasodilator Agents